# Lecithin

CASRN: 8002-43-5

## Drug Levels and Effects

### Summary of Use during Lactation

Lecithin is a mixture of choline, choline esters, fatty acids, glycerol, glycolipids, triglycerides, phosphoric acid, and phospholipids, such as phosphatidylcholine that are normal components of human milk. Supplemental lecithin has been recommended as a treatment for plugged milk ducts,[1-3] and as an additive to human milk that is given to preterm infants via pumping through plastic tubing in order to prevent fat loss.[4] No scientifically valid clinical studies exist on the safety and efficacy of high-dose lecithin supplementation in nursing mothers or infants. Most nursing mothers do not have adequate choline intake and mothers of preterm infants may have reduced levels of choline in milk and greater frequency of depression.[5-7] A meta-analysis found that higher maternal choline intake was likely to be associated with better child neurocognition and neurodevelopment.[8] The choline concentration in milk showed positive association with fine motor and adaptability developmental quotient in breastfed infants at 6 months of age.[9] Supplementation with one component of lecithin, phosphatidylcholine, increases choline, but not phosphatidylcholine concentrations in breastmilk and supplementation with choline increases choline metabolites, but not choline in breastmilk. Lecithin is usually well tolerated and is considered to be "generally recognized as safe" (GRAS) by the U.S. Food and Drug Administration.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

No published information was found as of the revision date on milk levels of lecithin following maternal supplementation. However, lecithin components such as choline and its esters are normally found in breastmilk.

Maternal Levels. A meta-analysis found that the average total water- and lipid-soluble choline (including choline esters) content of milk increased from 71.5 mg/L in colostrum to 152.2 mg/L in transitional milk, then stabilized at 145.0 mg/L in mature milk. The total choline concentration was higher in developing countries than in developed countries.[10]

A study of 94 women in China measured choline concentration in breastmilk over time. Choline concentration were 151.48 μmol/L (15.8 mg/L) at 15 days, 134.69 μmol/L (14.0 mg/L) at 30 days, and 119.00 μmol/L (12.4 mg/L) at 90 days postpartum, respectively.[11]

Lactating women were given either 480 or 930 mg of choline daily. Both doses increased the breastmilk content of the choline metabolites, phosphocholine, glycerophosphocholine, glycine and trimethylamine oxide.[12]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Scott CR. Lecithin: It isn't just for plugged milk ducts and mastitis anymore. Midwifery Today Int Midwife Winter 2005;76:26–7.16419666
2 McGuire E. Case study: White spot and lecithin. Breastfeed Rev 2015;23:23–5.25906494
3 Lawrence RA, Lawrence RM, Noble L, et al. Breastfeeding: A guide for the medical profession, 9th ed. Philadelphia: Elsevier; 2022.
4 Chan MM, Nohara M, Chan BR, et al. Lecithin decreases human milk fat loss during enteral pumping. J Pediatr Gastroenterol Nutr 2003;36:613–5.12717084
5 Minarski M, Maas C, Heinrich C, et al. Choline and betaine levels in plasma mirror choline intake in very preterm infants. Nutrients 2023;15:4758.38004152
6 Obeid R, Schön C, Derbyshire E, et al. A narrative review on maternal choline intake and liver function of the fetus and the infant; implications for research, policy, and practice. Nutrients 2024;16:260.38257153
7 Ottolini KM, Spurney G, Wisner KL, et al. Depressive symptoms associated with decreased choline intake in lactating mothers of preterm infants. Nutrients 2026;18:1728.42280371
8 Obeid R, Derbyshire E, Schön C. Association between maternal choline, foetal brain development and child neurocognition; systematic review and meta-analysis of human studies. Adv Nutr 2022;13:2445–57.36041182
9 Huang Q, Guo F, Zou H, et al. Association of breast milk betaine and related metabolites with neurodevelopment in 6-month-old infants: a prospective birth cohort study. Food Funct 2026;17:1885–98.41615294
10 Yang M, Zhou Y, Wu S, et al. Choline concentration and composition in human milk across lactation stages: a systematic review and meta-analysis. Crit Rev Food Sci Nutr 2026;66:1203–12.40913782
11 Liu P, Deng H, Chen H, et al. Fabrication of dBSA@Hemin@Ag nanozyme based biosensor and application for the assessment of longitudinal concentration changes of choline in human breast milk. Food Chem 2025;495 (Pt 2):146427.40975988
12 Davenport C, Yan J, Taesuwan S, et al. Choline intakes exceeding recommendations during human lactation improve breast milk choline content by increasing PEMT pathway metabolites. J Nutr Biochem 2015;26:903–11.26025328

## Substance Identification

### Substance Name

Lecithin

### CAS Registry Number

8002-43-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Choline

Food

Lecithins

Phospholipids